# Feverfew

CASRN: 89997-65-9

## Drug Levels and Effects

### Summary of Use during Lactation

Feverfew (Tanacetum parthenium) leaves contain sesquiterpene lactones, including parthenolide, which is thought to be the principal active ingredient. Feverfew has no specific lactation-related uses. It is most commonly used to prevent migraine. No data exist on the excretion of any components of feverfew into breastmilk or on the safety and efficacy of feverfew in nursing mothers or infants. Feverfew is generally well tolerated in adults, with occasional oral ulcers or gastrointestinal irritation. Rebound headaches can occur with rapid discontinuation and allergic reactions, including cross-reactions to chrysanthemums, daisies and marigolds, occur rarely. Because of the lack of safety data during lactation, some reviewers recommend against its use during breastfeeding.[1]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements (https://toxnet.nlm.nih.gov/help/LactMedDietarySupps.htm) is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Migraine Prophylaxis) Divalproex, Erenumab, Metoprolol, Nortriptyline, Propranolol, Rimegepant, Topiramate, Valproic Acid

### References

1 Amir LH, Pirotta MV, Raval M. (2011). Breastfeeding - Evidence based guidelines for the use of medicines. Aust Fam Physician.

## Substance Identification

### Substance Name

Feverfew

### Scientific Name

Tanacetum parthenium

### CAS Registry Number

89997-65-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal